# Clonixin

CASRN: 17737-65-4

## Drug Levels and Effects

### Summary of Use during Lactation

Clonixin is not approved for marketing in the United States by the U.S. Food and Drug Administration but is available in other countries. No information is available on the use of clonixin during breastfeeding. An alternate drug is preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

## Substance Identification

### Substance Name

Clonixin

### CAS Registry Number

17737-65-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Inflammatory Agents, Non-Steroidal